# Enoxaparin

CASRN: 679809-58-6

## Drug Levels and Effects

### Summary of Use during Lactation

Maternal enoxaparin in doses up to 40 mg daily do not to cause any adverse effects in breastfed infants. Because its large molecular weight of 2000 to 8000 daltons, enoxaparin would not be expected to be excreted into breastmilk or to be absorbed from breastmilk by the infant. No special precautions are required.[1]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Ten women received enoxaparin 20 mg and 2 received 40 mg daily by subcutaneous injection from the prepartum to the postpartum period. At 5 to 7 days postpartum, anti-Xa activity (a measurement of enoxaparin anticoagulant activity) was undetectable in their 12 completely breastfed term neonates 1.5 to 3 hours after they were breastfed for at least 5 days. No bleeding was detected among the infants during maternal enoxaparin therapy.[2]

A pregnant woman suffered blood clots in the sinuses and 2 small intracranial hemorrhages at 8 weeks of gestation, followed by status epilepticus. She was treated with enoxaparin 40 mg twice daily throughout pregnancy and for 3 months postpartum as well as levetiracetam and lacosamide. Her infant was about 50% breastfed for the first 15 days of life. The infant showed normal development at 7 months of age.[3]

Following a successful uterus transplant and embryo transfer, a newborn infant was breastfed by a mother taking tacrolimus, azathioprine 150 mg (2 mg/kg), prednisone 5 mg, and enoxaparin 40 mg daily. The tacrolimus dosage was adjusted to achieve a serum concentration of 5 to 7 mcg/L. The mother breastfed (exclusively?) for 8 weeks and weaned over the next 4 weeks. At 15 months, the infant was achieving all developmental milestones.[4]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Acenocoumarol, Dalteparin, Enoxaparin, Heparin, Rivaroxaban, Warfarin

### References

1 Bates SM, Rajasekhar A, Middeldorp S, et al. American Society of Hematology 2018 guidelines for management of venous thromboembolism: Venous thromboembolism in the context of pregnancy. Blood Adv 2018;2:3317–59.30482767
2 Guillonneau M, de Crepy A, Aufrant C, et al. Breast-feeding is possible in case of maternal treatment with enoxaparin. Arch Pediatr (Paris) 1996;3:513–4.8763733
3 Ylikotila P, Ketola RA, Timonen S, et al. Early pregnancy cerebral venous thrombosis and status epilepticus treated with levetiracetam and lacosamide throughout pregnancy. Reprod Toxicol 2015;57:204–6.26187779
4 Deans R, Gerstl B, Shand AW, et al. The first live term birth following uterus transplantation in Australia. Med J Aust 2025;223:404–9.40406819

## Substance Identification

### Substance Name

Enoxaparin

### CAS Registry Number

679809-58-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anticoagulants

Low Molecular Weight Heparin